# Methyclothiazide

CASRN: 135-07-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the amount of methyclothiazide in breastmilk. Intense diuresis with large doses may decrease breastmilk production. Other diuretics in low doses are preferred over methyclothiazide.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information on methyclothiazide was not found as of the revision date. Intense diuresis with thiazides and thiazide-like diuretics, fluid restriction and breast binding have been used to suppress postpartum lactation.[1-3] The added contribution of the diuretic to these measures, which are effective in suppressing lactation, has not been studied. There are no data on the effects of diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;1:1353-4.doi:10.1016/S0140-6736(61)90289-6 4134342
2 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90 13973786
3 Stout G. Suppression of lactation. Br Med J 1962;1:1150 18117911

## Substance Identification

### Substance Name

Methyclothiazide

### CAS Registry Number

135-07-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics